# Fenugreek

CASRN: 68990-15-8

## Drug Levels and Effects

### Summary of Use during Lactation

Fenugreek (Trigonella foenum-graecum) seeds contain mucilage, quercetin, luteolin, genistein, vitexintrigonelline, 4-hydroxyisoleucine, sotolon, diosgenin, luteolin, protodioscin and several other pharmacologically active saponins and isoflavones. Fenugreek has been used in many geographical regions worldwide as a galactogogue to increase milk supply and is included in numerous proprietary mixtures promoted to increase milk supply.[1-15] The galactogogue effect of fenugreek may be primarily psychological in humans;[16] however, some studies indicate that fenugreek might work by increasing insulin, prolactin and oxytocin secretion.[12,17,18] One meta-analysis found fenugreek to have a mild galactogogue effect and unknown safety profile, while another meta-analysis found no good evidence that it is a galactogogue.[13,19] In a US survey, of 122 mothers who used fenugreek as a galactogogue 43% thought it increased milk supply and 5% thought it decreased their milk supply.[20] Some evidence indicates that fenugreek might be more effective in the first few days postpartum than after 2 weeks postpartum.[21] Some of these studies used a multi-ingredient combination products in which fenugreek was only one component, so the results might be different from studies in which fenugreek was used alone. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[22,23]

Fenugreek is "generally recognized as safe" (GRAS) as a flavoring by the U.S. Food and Drug Administration. Limited scientific data exist on the safety of fenugreek in nursing mothers or infants, although it has a long history of use as a food and medicine in India and China. When used as a medicinal, it is generally well tolerated in adults, but gastrointestinal side effects such as diarrhea, flatulence, nausea, and vomiting may occur. Liver toxicity has been reported, both taken alone and in herbal combinations that included fenugreek.[24-27] Diarrhea and hepatomegaly occurred in a woman taking fennel, fenugreek, and goat's rue as galactogogues.[17] Another mother reported increased heart rate and breast congestion.[28] Allergic reactions, exacerbation of asthma, and a 14% decrease in serum potassium have been reported. One nursing mother developed toxic epidermal necrolysis thought to be caused by her intake of fenugreek as a galactogogue. Cross-reaction with chickpeas, peanuts, and other legumes is possible. Dosages typically used to increase milk supply are 1 to 6 grams daily; in dosages of about 25 grams or more daily, fenugreek may lower cholesterol and blood sugar. It can also interact with warfarin to cause bleeding. Caution should be used in giving high dosages to women with diabetes mellitus or those taking warfarin. In a survey of nursing mothers in the United States, 85 had used fenugreek as a galactogogue and 45% reported having experienced an adverse reaction from the supplement.[29] Perhaps its most unusual side effect is the imparting an odor of maple syrup to the urine, sweat, feces, and possibly breastmilk by the sotolon in fenugreek.[3,30-32]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

No components of fenugreek have been measured in milk after its ingestion, but some have been measured after the ingestion of other foods. Quercetin can be found in breastmilk of mothers with normal diets.[33]

Maternal Levels. Milk samples from 17 nursing mothers on uncontrolled diets were taken at 1, 4 and 13 weeks postpartum at times between 10 am and 1 pm. Average quercetin levels in breastmilk were 48 nmol/L at week 1, 60 nmol/L at week 4 and 51 nmol/L at week 13. Kaempferol concentrations ranged from 7.8 to 71.4 nmol/L, increasing from weeks 1 to 13 (and from weeks 4 to 13. Because of the uncontrolled diet and varying sampling times, the range of values among individuals was large.[34]

Quercetin was measured in the milk of 11 mothers after they received an onion soup that contained either 0.8 or 1 mg/kg of quercetin glucosides. A baseline milk sample was obtained after a 5-day low-quercetin diet, and 7 milk samples were obtained over the 48 hours following soup ingestion. Baseline total (from conjugated and unconjugated) quercetin in breastmilk averaged 45 nmol/L. An average peak milk quercetin level of 68 nmol/L was attained at an average of 11.9 hours after the soup meal. The average half-life of quercetin in breastmilk was 50.3 hours.[35]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study in mothers of preterm infants less than 31 weeks gestation compared the use of fenugreek 1725 mg 3 times daily for 21 days to placebo. No adverse effects were noted in the infants given the breastmilk.[36]

A small manufacturer-sponsored, double-blind, randomized study compared Mother's Milk tea (Traditional Medicinals, Sebastopol, CA) to lemon verbena tea in exclusively breastfeeding mothers with milk insufficiency. Each Mother's Milk tea bag contained 35 mg of fenugreek seeds as well as several other herbs. Mothers were instructed to drink 3 to 5 cups of tea daily. No differences were seen between groups in infant digestive, respiratory, dermatological, and other maternal-reported adverse events. No differences were seen in the growth parameters of the breastfed infants between the two groups.[37]

In a study of exclusively nursing mothers receiving fenugreek seed 200 mg, turmeric 100 mg and ginger 120 mg (Fenucaps; Herbal Acharn's Home Co. Ltd., Thailand) 3 times daily for 4 weeks, no adverse events were reported in their infants, although the method used to determine this finding were not reported.[38]

In a survey of nursing mothers in Australia, 421 mothers were taking fenugreek as a galactogogue. Seventeen percent of mothers taking fenugreek reported experiencing adverse reactions, most commonly weight gain and various gastrointestinal effects.[39]

### Effects on Lactation and Breastmilk

Forty women who complained of an insufficient milk supply at 5 days postpartum were given a combination herbal supplement as 2 capsules of Lactare (Pharma Private Ltd., Madras, India) 3 times daily. Each capsule contained wild asparagus 200 mg, ashwagandha (Withania somnifera) 100 mg, fenugreek 50 mg, licorice 50 mg, and garlic 20 mg. By day 4 of therapy, no infants required supplementary feeding. Infants were weighed before and after each feeding on the fifth day of maternal therapy to determine the amount of milk ingested. On the day of the test weighing, infants' milk intake averaged 388 mL, and the fluid and caloric intake was considered adequate.[40] This study cannot be considered as valid evidence of a galactogogue effect of these herbs because it lacks randomization, blinding, a placebo control, and maternal instruction in breastfeeding technique. Additionally, infants were breastfed only 6 to 8 times daily, which is insufficient to maximize milk supply.

A study of healthy women who delivered a full-term infant and desired to breastfeed for at least 4 months compared fenugreek, torbangun (Coleus amboinicus) and a product containing placental extract and vitamin B12 (Molocco+B12) for their effects on breastmilk volume. No mention was made of any breastfeeding support provided to the women. Participants were randomly assigned to receive one of the products for 30 days and followed for another 30 days. Capsules containing powdered fenugreek seeds 600 mg (Bullivants Natural Health, Auckland, New Zealand) were given 3 times daily. Infants were weighed before and after each nursing at 2-week intervals during the study to measure 24-hour milk volume. At no time point during the study was milk volume in the fenugreek group (n = 22) statistically different from the reference group (n = 22) who received Molocco+B12, although the torbangun group did have a statistically significant increase. The daily volume of milk actually decreased in the fenugreek group over time, although the change was not statistically significant.[41] The dosage of fenugreek used in this study was lower than that typically recommended by most sources.[2,42]

A randomized, double-blind study in 26 mothers of preterm infants less than 31 weeks gestation compared pharmacist-prepared capsules of fenugreek 1725 mg (n=14) or placebo (n=12), each given 3 times daily for 21 days, starting on day 5 postpartum. Mothers used an electric breast pump 5 to 7 times daily for 21 days starting 12 hours postpartum and recorded pumping frequency and milk volume. Maternal serum prolactin was also measured once weekly during the 21 days. No statistical differences were found in milk volumes or serum prolactin values between the two groups on day 5, 10 or 15 of the study.[36] Although this was a well-designed study, over half of the originally randomized mothers (n=58) did not complete the study and an intention-to-treat analysis was not performed.

Sixty-six postpartum mothers (22 in each of 3 groups) with no concurrent illnesses were randomly assigned to receive an herbal tea, placebo, or nothing after delivering healthy, full-term infants. Mothers in the herbal tea group received at least 3 cups daily of 200 mL of Still Tea (Humana-Istanbul, Türkiye; containing hibiscus 2.6 grams, fennel extract 200 mg, fennel oil 20 mg, rooibos 200 mg, verbena [vervain] 200 mg, raspberry leaves 200 mg, fenugreek 100 mg, goat's rue 100 mg, and vitamin C 500 mg per 100 grams, per manufacturer's web site November 2011). A similar-looking apple tea was used as the placebo. All women were followed by the same nurse and pediatrician who were blinded to what treatment the mothers received. Mothers who received Still Tea produced more breastmilk with an electric breast pump on the third day postpartum than mothers in the other groups. The infants in the Still Tea group had a lower maximum weight loss, and they regained their birth weights sooner than those in the placebo or no treatment arms. No long-term outcome data were collected. Because many of the ingredients in Still Tea are purported galactogogues, no single ingredient can be considered solely responsible for the tea's effects, although the authors attributed the action to fenugreek.[43]

An herbal tea containing fenugreek, hibiscus, fennel, rooibos, vervain, raspberry, goat's rue, and vitamin C (Humana Still-Tee, Humana GmbH, Herford, Germany) or water was randomly given to nursing mothers in a dosage of 3 cups daily beginning on the day of delivery. Several markers of antioxidant capacity were measured in breastmilk on day 1 and again after 7 to 10 days. No difference was found in the markers between mothers who received the tea and the water.[44]

A nonblinded study randomized mother to receive 2 grams of fenugreek as a tea three times a day, 100 grams of palm date flesh three times a day, or nothing beginning on the first day postpartum. The duration of therapy was not stated. Their full-term, healthy infants were weighed on days 3, 7 and 14 of age, and mothers measured the morning (only) milk volume from both breasts on the third day postpartum. The infants of the fenugreek and date flesh groups lost less weight on days 3 and 7 than the control mothers, but there was no difference in weight among the groups on day 14. On day 3, morning milk volumes were greater in the two treated groups than in the untreated group.[45] The lack of blinding and incomplete milk collection call the results into question.

A nonblinded study compared several infant growth parameters after their mothers were randomized to receive either black tea or black tea plus 7.5 grams of fenugreek three times daily. Infants were healthy girls and ranged from 0 to 4 months old (mean about 2 months). At baseline, control mothers were breastfeeding two times more per day than the fenugreek group (11.2 vs 9.2 times daily). At the end of the 4 week study, several parameters were greater in the fenugreek group than in the control group: frequency of feeding infant weight, head circumference, and daily numbers of wet diapers and defecation. No difference was seen in infant height.[46]

In a survey of 188 nursing women from 27 states (52% from Louisiana), 85 (46%) had used fenugreek as a galactogogue. Of those who used it, 54% felt that it increased their milk supply and 45% reported side effects, including a maple syrup smell emitted from the mother's body, gassiness in the baby, or breastmilk oversupply.[29]

A nonrandomized, nonblinded case-control study compared healthy age-matched postpartum mothers of preterm newborns admitted to the NICU who either received (n = 30) or did not receive 200 mL of fenugreek tea (n = 30) containing 50 grams of fenugreek seed 3 times daily. The allocation method was not stated, but the groups were well matched. Each group pumped milk with a breast pump 8 times daily. Milk volume was measured on days 3, 8 and 15 of the study; maternal serum prolactin was measured on days 3 and 15. Milk volumes were significantly different only on day 3 postpartum, favoring the fenugreek group (275 vs 246 mL). The fenugreek group also had higher serum prolactin values only on day 3 (153 vs 135 mcg/L). The authors concluded that fenugreek affects only the early stage of lactogenesis, and not production of mature milk.[21]

Fifty women in Thailand who were 1 month postpartum and exclusively breastfeeding were randomized to receive either a placebo or capsules containing fenugreek seed 200 mg, turmeric 100 mg and ginger 120 mg (Fenucaps; Herbal Acharn's Home Co. Ltd., Thailand) 3 times daily for 4 weeks. Participants pumped milk on 2 days at 0, 2 and 4 weeks of the study. The average milk volumes increased by 49% at 2 weeks and 103% at 4 weeks among participants receiving the active product. The macronutrient composition of the milk did not change in either group over the 4-week period. Growth of infants was not reported.[38]

A study compared standard care (n = 30) to standard care plus fenugreek 7.5 grams daily for 7 days (n = 30) in mothers of full-term infants who appeared to have low milk supply in the first week postpartum. Infants in the treatment group had more frequent urination than those in the control group over the 7 days of the study. On day 7, the average weights of the infants in the treatment group were slightly greater.[47] The study was unblinded and had no true placebo control, so its results are questionable.

In a survey of nursing mothers in Australia, 421 mothers were taking fenugreek as a galactogogue. On average, mothers rated fenugreek between “slightly effective” and “moderately effective” on a Likert scale. Seventeen percent of mothers taking fenugreek reported experiencing adverse reactions, most commonly stomach cramps, nausea, dry mouth, body odor, weight gain and headache.[39]

A blinded, randomized trial compared fenugreek drops to fenugreek and honey drops in nursing mothers who were 1 to 5 months postpartum. A 21-question questionnaire assessing breastfeeding success was completed by mothers at the beginning of the study and 4 weeks later. The mothers who received the honey-containing product (n = 36) had a higher score and a greater increase in score than those who received fenugreek alone (n = 39).[48]

A randomized, blinded trial compared lactation cookies containing oatmeal, brewer’s yeast, flax seeds, and fenugreek (Oatmeal Raisin Milkmakers Lactation Cookie Bites, Munchkin Inc.) were compared to similar cookies with no purported galactogogues (Famous Amos Chocolate Chip Cookies). Subjects were women nursing full-term 2-month-old infants (n = 176) and instructed to eat one bag of cookies daily for 30 days. They pumped their breasts completely with an electric pump at the start and end of the study. The milk production rate was 5.8 mL/hour in control participants and 5.5 mL/hour in the lactation cookie participants, which was not statistically significant difference.[49]

A non-blinded, non-masked study randomized mothers with poor milk supply in the first week postpartum to either usual care (n = 30) or usual care plus 10 grams of fenugreek water that had been soaked overnight (n = 30). On the first, third, and seventh days, the babies had their weights and frequency of urination compared. Frequency of urination and weight gain were greater in the treated mothers’ infants.[50]

A cross-sectional study of 332 postpartum women in Saudi Arabia was reported as a preprint. The study found that over half reported using fenugreek in the first 6 months postpartum. No statistically significant association was found between fenugreek use and breastfeeding duration. However, the odds of breastfeeding duration for 12 months or more with fenugreek use in the first four months were higher when compared to the duration of three months or less.[51]

A study in Iran was conducted in 68 mothers with preterm newborns less than 32 weeks gestational age. About 500 mg of fenugreek and placebo capsules were administered to the participants three times a day, from day 5 after delivery to day 14 in a randomized, blinded fashion. On the seventh day of the intervention, milk volume was significantly higher in the fenugreek group than in the placebo group. But no statistically significant difference was observed between groups in milk volume or prolactin level on day 15. Moreover, no statistically significant difference was observed between groups regarding newborn weight after intervention or satisfaction with breastfeeding. None of the participants reported any side effects.[52] Although well designed, this study appeared to be underpowered to detect any differences in outcomes.

A meta-analysis of randomized, controlled studies in the mothers of preterm neonates examined the efficacy of various herbal galactogogues in increasing milk supply. The authors concluded that fenugreek seed capsules did not show an increase in milk volume at day 4 and there is very low certainty evidence that fenugreek seed capsules do not increase milk volume at day 10.[13,19]

### References

1 Allaire AD, Moos MK, Wells SR. Complementary and alternative medicine in pregnancy: A survey of North Carolina certified nurse-midwives. Obstet Gynecol 2000;95:19–23.10636495
2 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54–8.19161049
3 Ulbricht C, Basch E, Burke D, et al. Fenugreek (Trigonella foenum-graecum L. Leguminosae): an evidence-based systematic review by the natural standard research collaboration. J Herb Pharmacother 2007;7:143–77.18928139
4 Sayed NZ, Deo R, Mukundan U. Herbal remedies used by Warlis of Dahanu to induce lactation in nursing mothers. Indian J Tradit Knowl 2007;6:602–5. https://nopr.niscpr.res.in/handle/123456789/1009
5 Alachkar A, Jaddouh A, Elsheikh MS, et al. Traditional medicine in Syria: Folk medicine in Aleppo governorate. Nat Prod Commun 2011;6:79–84.21366051
6 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317–8.22224508
7 Dietz BM, Hajirahimkhan A, Dunlap TL, et al. Botanicals and their bioactive phytochemicals for women's health. Pharmacol Rev 2016;68:1026–73.27677719
8 Javan R, Javadi B, Feyzabadi Z. Breastfeeding: A review of its physiology and galactogogue plants in view of traditional Persian medicine. Breastfeed Med 2017;12:401–9.28714737
9 Khan TM, Wu DB, Dolzhenko AV. Effectiveness of fenugreek as a galactagogue: A network meta-analysis. Phytother Res 2018;32:402–12.29193352
10 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
11 Sibeko L, Johns T. Global survey of medicinal plants during lactation and postpartum recovery: Evolutionary perspectives and contemporary health implications. J Ethnopharmacol 2021;270:113812.33450288
12 Shawky E, Nassra RA, El-Alkamy AMT, et al. Unraveling the mechanisms of fenugreek seed for managing different gynecological disorders: Steroidal saponins and isoflavones revealed as key bioactive metabolites. J Pharm Biomed Anal 2024;238:115865.38000191
13 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
14 Eid AM, Jaradat N. Public knowledge, attitude, and practice on herbal remedies used during pregnancy and lactation in West Bank Palestine. Front Pharmacol 2020;11:46.32116721
15 Hussain K, Alshaqhaa MA, Ain N, et al. Medicinal plants used during childbirth and maternal-neonatal healthcare in Punjab, Pakistan. Res J Pharmacogn 2026;13:43–58. doi:10.22127/rjp.2026.578423.3127
16 Sim TF, Laetitia Hattingh, H, Sherriff J, et al. The use, perceived effectiveness and safety of herbal galactagogues during breastfeeding: A qualitative study. Int J Environ Res Public Health 2015;12:11050–71.26371019
17 Sevrin T, Boquien CY, Gandon A, et al. Fenugreek stimulates the expression of genes involved in milk synthesis and milk flow through modulation of insulin/gh/igf-1 axis and oxytocin secretion. Genes (Basel) 2020;11:1208.33081164
18 Srinivas R, Eagappan K, Sasikumar S. The effect of naturally formulated galactogogue mix on breast milk production, prolactin level and short-term catch-up of birth weight in the first week of life. Int J Health Sci Res 2014;4:242–53. https://www.ijhsr.org/IJHSR_Vol.4_Issue.10_Oct2014/35.pdf
19 Cragg A, Levene I, Darabi S, et al. Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146–58.41350450
20 Ryan RA, Hepworth AD, Lyndon A, et al. Use of galactagogues to increase milk production among breastfeeding mothers in the United States: A descriptive study. J Acad Nutr Diet 2023;123:1329–39.37236347
21 Abdou RM, Fathey M. Evaluation of early postpartum fenugreek supplementation on expressed breast milk volume and prolactin levels variation. Gaz Egypt Paediatr Assoc 2018;66:57–60. doi:10.1016/j.epag.2018.07.003
22 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
23 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
24 Şahin B, Kaymaz N, Yıldırım S. Herbal remedies for perceived inadequate milk supply are perhaps not as safe as women think: A brief case report. Women Birth 2016;29:e133.27396295
25 Hillman L, Gottfried M, Whitsett M, et al. Clinical features and outcomes of complementary and alternative medicine induced acute liver failure and injury. Am J Gastroenterol 2016;111:958–65.27045922
26 Partiula B, Dougherty R. The dangers of herbal supplements: A case of acute liver injury from fenugreek. Am J Gastroenterol 2017;112 (Suppl 1):S1247–S8. doi:10.14309/00000434-201710001-02274
27 Silverman AL, Kumar A, Borum ML. Re: "Herbal use during breastfeeding" by Anderson (Breastfeed Med 2017;12(9):507-509). Breastfeed Med 2018;13:301.29757695
28 Steyn N, Zunza M, Decloedt EH. A cross-sectional descriptive study of breastfeeding behaviour and galactogogue use among private-sector patients in Cape Town, South Africa. S Afr J Obstet Gynaecol 2017;23:20–3. doi:10.7196/SAJOG.2017.v23i1.1116
29 Bazzano AN, Cenac L, Brandt AJ, et al. Maternal experiences with and sources of information on galactagogues to support lactation: A cross-sectional study. Int J Womens Health 2017;9:105–13.28280392
30 Betzold CM. Galactagogues. J Midwifery Womens Health 2004;49:151–4.15010670
31 Tiran D. The use of fenugreek for breast feeding women. Complement Ther Nurs Midwifery 2003;9:155–6.12852932
32 Bentele-Jaberg N, Guenova E, Mehra T, et al. The phytotherapeutic fenugreek as trigger of toxic epidermal necrolysis. Dermatology 2015;231:99–102.26138328
33 Williamson G, Clifford MN. A critical examination of human data for the biological activity of quercetin and its phase-2 conjugates. Crit Rev Food Sci Nutr 2025;65:1669–705.38189312
34 Song BJ, Jouni ZE, Ferruzzi MG. Assessment of phytochemical content in human milk during different stages of lactation. Nutrition 2013;29:195–202.23237648
35 Romaszko E, Wiczkowski W, Romaszko J, et al. Exposure of breastfed infants to quercetin after consumption of a single meal rich in quercetin by their mothers. Mol Nutr Food Res 2014;58:221–8.23963751
36 Reeder C, Legrand A, O’Conner-Von SK. The effect of fenugreek on milk production and prolactin levels in mothers of premature infants. Clin Lact (Amarillo) 2013;4:159–65. doi:10.1891/2158-0782.4.4.159
37 Wagner CL, Boan AD, Marzolf A, et al. The safety of Mother's Milk(R) Tea: Results of a randomized double-blind, controlled study in fully breastfeeding mothers and their infants. J Hum Lact 2019;35:248–60.30005170
38 Bumrungpert A, Somboonpanyakul P, Pavadhgul P, et al. Effects of fenugreek, ginger, and turmeric supplementation on human milk volume and nutrient content in breastfeeding mothers: A randomized double-blind controlled trial. Breastfeed Med 2018;13:645–50.30411974
39 McBride GM, Stevenson R, Zizzo G, et al. Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One 2021;16:e0254049.34197558
40 Sholapurkar ML. 'Lactare' for improving lactation. Indian Pract 1986;39:1023–6.
41 Damanik R, Wahlqvist ML, Wattanapenpaiboon N. Lactagogue effects of Torbangun, a Bataknese traditional cuisine. Asia Pac J Clin Nutr 2006;15:267–74.16672214
42 Gabay MP. Galactogogues: Medications that induce lactation. J Hum Lact 2002;18:274–9.12192964
43 Turkyılmaz C, Onal E, Hirfanoglu IM, et al. The effect of galactagogue herbal tea on breast milk production and short-term catch-up of birth weight in the first week of life. J Altern Complement Med 2011;17:139–42.21261516
44 Kavurt S, Bas AY, Yucel H, et al. The effect of galactagogue herbal tea on oxidant and anti-oxidant status of human milk. J Matern Fetal Neonatal Med 2013;26:1048–51.23363373
45 El Sakka A, Salama M, Salama K. The effect of fenugreek herbal tea and palm dates on breast milk production and infant weight. Journal of Pediatric Sciences 2014;6:e202. doi:10.17334/jps.30658
46 Ghasemi V, Kheirkhah M, Vahedi M. The effect of herbal tea containing fenugreek seed on the signs of breast milk sufficiency in Iranian girl infants. Iran Red Crescent Med J 2015;17:e21848.26430522
47 Ravi R, Joseph J. Effect of fenugreek on breast milk production and weight gain among infants in the first week of life. Clin Epidemiol Glob Health 2020;8:656–60. doi:10.1016/j.cegh.2019.12.021
48 Simbar M, Nazarpour S, Mojab F, et al. A comparative study on the effects of "honey and fenugreek" with "fenugreek" on the breastfeeding success: A randomized trial. Evid Based Complement Alternat Med 2022;2022:6048280.35783511
49 Palacios AM, Cardel MI, Parker E, et al. Effectiveness of lactation cookies on human milk production rates: A randomized controlled trial. Am J Clin Nutr 2023;117:1035–42.36921902
50 Prakasam A, Darji P, Kumar PM, et al. Therapeutic benefits of fenugreek on breast milk production and weight gain among newborns. Journal of Natural Remedies 2024;24:2795–805. doi:10.18311/jnr/2024/35635
51 Alkhlassi SN, Aljanubi MF, Alobaidi LS, et al. The association between the consumption of fenugreek and the duration of breastfeeding among postpartum women living in Saudi Arabia. preprint 2025
52 Rouhi M, Hossieni MB, Khodaie L, et al. Investigating the effectiveness of fenugreek on the quantity of breast milk and the level of prolactin in mothers of preterm newborns: A randomized controlled clinical trial. Curr Drug Res Rev 2025;17:471–80.41239794

## Substance Identification

### Substance Name

Fenugreek

### Scientific Name

Trigonella foenum-graecum

### CAS Registry Number

68990-15-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal